# Tirofiban

CASRN: 144494-65-5

## Drug Levels and Effects

### Summary of Use during Lactation

Tirofiban is an antiplatelet drug given by intravenous infusion. Its oral bioavailability has not been studied in humans, but is only 2.2% in rats. No information is available on the drug’s use during breastfeeding, but infants would not be expected to absorb clinically relevant amounts of the drug from milk. If a mother requires tirofiban, it is not a reason to discontinue breastfeeding, but monitor the infant for bruising or bleeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Tirofiban

### CAS Registry Number

144494-65-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Fibrinolytic Agents

Platelet Aggregation Inhibitors